# Trastuzumab Deruxtecan

CASRN: 1826843-81-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of trastuzumab deruxtecan during breastfeeding. Because trastuzumab is a large protein molecule with a molecular weight of 145,531 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. However, deruxtecan (DXd) is a small-molecule topoisomerase 1 inhibitor, which might be excreted into milk. The manufacturer recommends that breastfeeding be discontinued during trastuzumab deruxtecan therapy and for 7 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Trastuzumab Deruxtecan

### CAS Registry Number

1826843-81-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents

Immunoconjugates

Topoisomerase I Inhibitors